# Entecavir

CASRN: 142217-69-4

## Drug Levels and Effects

### Summary of Use during Lactation

Entecavir has not been studied in nursing mothers being treated for hepatitis B infection. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

No differences exist in infection rates between breastfed and formula-fed infants born to hepatitis B-infected women, as long as the infant receives hepatitis B immune globulin and hepatitis B vaccine at birth. Mothers with hepatitis B are encouraged to breastfeed their infants after their infants receive these preventative measures.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis B) Interferon Alfa, Lamivudine, Tenofovir

### References

1 Visvanathan K, Dusheiko G, Giles M, et al. (2016). Managing HBV in pregnancy. Prevention, prophylaxis, treatment and follow-up: Position paper produced by Australian, UK and New Zealand key opinion leaders. Gut.
2 Dionne-Odom J, Tita AT, Silverman NS. (2016). #38: Hepatitis B in pregnancy screening, treatment, and prevention of vertical transmission. Am J Obstet Gynecol.

## Substance Identification

### Substance Name

Entecavir

### CAS Registry Number

142217-69-4

### Drug Class

Breast Feeding

Lactation

Antiviral Agents